# Ticarcillin and Clavulanic Acid

CASRN: 86482-18-0

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that ticarcillin produces low levels in milk that are not expected to cause adverse effects in breastfed infants. Clavulanic acid has not been studied in nursing mothers. Occasionally disruption of the infant's gastrointestinal flora, resulting in diarrhea or thrush have been reported with penicillins, but these effects have not been adequately evaluated. Ticarcillin and clavulanic acid is acceptable is acceptable in nursing mothers.

### Drug Levels

Maternal Levels. No studies on the combination of ticarcillin and clavulanic acid during breastfeeding have been reported. Only trace levels of ticarcillin were detected for 6 hours after single 1 gram intramuscular doses in 3 women in one study[1,2] and 5 women in another early study.[3]

After ticarcillin doses of 5 grams intravenously three times a day in 10 women, milk levels averaged 2 to 2.5 mg/L. By 12 hours after the last dose, ticarcillin was undetectable in the milk. The total daily intake of a breastfed infant would be negligible.[4]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Matsuda S, Tanno M, Kashiwakura T, et al. Laboratory and clinical use of ticarcillin. Chemotherapy (Tokyo) 1977;25:2924-31
2 Matsuda S. Transfer of antibiotics into maternal milk. Biol Res Pregnancy Perinatol 1984;5:57-60 6743732
3 Cho N, Nakayama T, Uehara K, et al. Laboratory and clinical evaluation of ticarcillin in the field of obstetrics and gynecology. Chemotherapy (Tokyo) 1977;25:2911-23
4 von Kobyletzki D, Dalhoff A, Lindemeyer H, et al. Ticarcillin serum and tissue concentrations in gynecology and obstetrics. Infection 1983;11:144-9 6885173

## Substance Identification

### Substance Name

Ticarcillin and Clavulanic Acid

### CAS Registry Number

86482-18-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antibacterial Agents

Penicillins